# Lifitegrast

CASRN: 1025967-78-5

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Breastmilk levels of lifitegrast have not been measured in humans. Because absorption from the eye is limited, ophthalmic lifitegrast would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Lifitegrast

### CAS Registry Number

1025967-78-5

### Drug Class

- Breast Feeding
- Lactation
- Lymphocyte Function-Associated Antigen-1 Antagonist